# Copper Cu 64 Dotatate

CASRN: 1426155-87-4

## Drug Levels and Effects

### Summary of Use during Lactation

Copper Cu 64 dotatate is a radiolabeled somatostatin analog indicated for use with positron emission tomography for localization of somatostatin receptor positive neuroendocrine tumors. No information is available on the use of copper Cu 64 dotatate during breastfeeding. The manufacturer recommends that breastfeeding be interrupted for 12 hours after copper Cu 64 dotatate administration.

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[1]

### Drug Levels

Copper Cu 64 decays to nickel 64 (Ni 64) with a half-life of 12.7 hours by positron emission followed by emission of two 511 keV annihilation photons. It also decays to Ni 64 by electron capture and to zinc 64 by beta decay.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Copper Cu 64 Dotatate

### CAS Registry Number

1426155-87-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals